# Oxacillin

CASRN: 66-79-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that oxacillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Oxacillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After 3 to 4 doses of oxacillin 500 mg orally in 10 women, the highest level detected was 0.2 mg/L in two women 4 hours after the dose. In the other 8 women, milk levels were less than 0.2 mg/L at times between 1 and 3.75 hours after the dose.[1]

One woman received oral oxacillin 3 grams daily. After the third dose, milk oxacillin levels ranged from 0.04 to 0.1 mg/L, with the peak occurring at 3 hours after the dose. The authors estimated that a breastfed infant would receive 0.3 mg daily of oxacillin in milk.[2]

In 10 women with mastitis who received 1 gram of oxacillin orally 3 times daily for 5 to 6 days, the average milk concentrations ranged from 0.43 to 0.68 mg/L.[3]

Repeated injections of oxacillin 1 gram intramuscularly every 6 hours for 6 to 9 days in 15 women with unilateral mastitis yielded oxacillin milk levels that reached a peak of 0.49 mg/L at 3 hours after the first dose on the first day in the healthy breast, and somewhat lower levels in the breast with mastitis. After the last dose, peak milk levels of 0.64 mg/L occurred 6 hours after the dose in the unaffected breast with slightly lower levels in the breast with mastitis.[4]

After a single intramuscular dose of 500 mg of oxacillin in 2 women, milk levels ranged from 0.18 to 0.7 mg/L between 1 and 4 hours, with the peak occurring at 2 to 4 hours after the dose. Only a trace was detectable at 6 hours after the dose.[5]

In 15 women given a single 1 gram dose of oxacillin intravenously, milk levels averaged 0.68 mg/L at 2 hours after the dose.[6]

Infant Levels. Ten women with mastitis received 1 gram of oxacillin orally 3 times daily for 5 to 6 days. Oxacillin was detectable in the urine in 5 of 6 of the breastfed infants in whom it was measured. Urine concentrations ranged from 0.2 to 3.7 mg/L.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cefazolin, Cephalexin, Dicloxacillin, Floxacillin, Methicillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Var L, Ince I, Topuzoglu A, et al. Management of postpartum manic episode without cessation of breastfeeding: A longitudinal follow up of drug excretion into breast milk. Eur Neuropsychopharmacol 2013;23 (Suppl 2):S382. https://www.sciencedirect.com/journal/european-neuropsychopharmacology/vol/23/suppl/S2
2 Borderon E, Soutoul JH, Borderon JC, et al. Excretion of antibiotics in human milk. Med Mal Infect 1975;5:373-6
3 Peiker G, Schroder S. The concentration of oxacillin and ampicillin (Penstabil) in mother's milk in puerperal mastitis. Pharmazie 1986;41:793-5 3562514
4 Kulakov VI, Zak IR, Kulikova NN, et al. Body pharmacokinetics of methicillin, oxacillin and cephaloridine in puerperal mastitis. Antibiotiki 1981;26:110-3 7212690
5 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60 6743732
6 Zhang Y, Zhang Q, Xu Z. Tissue and body fluid distribution of antibacterial agents in pregnant and lactating women. Zhonghua Fu Chan Ke Za Zhi 1997;32:288-92 9596854

## Substance Identification

### Substance Name

Oxacillin

### CAS Registry Number

66-79-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins